# Meropenem

CASRN: 96036-03-2

## Drug Levels and Effects

### Summary of Use during Lactation

Although no information is available on the use of meropenem during breastfeeding, milk levels appear to be low and beta-lactams are generally not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with beta-lactams, but these effects have not been adequately evaluated. Vaborbactam, which is available in combination with meropenem in the product Vabomere, has not been studied in nursing mothers, but the combination is expected to have similar concerns as with meropenem alone.

### Drug Levels

Maternal Levels. A woman with a history of NYHA class I heart failure was 3 days postpartum and developed a urinary tract infection and was treated with cephalexin until it was found that the organism was resistant to extended-spectrum beta-lactams. On day 6 postpartum, meropenem 1 gram IV every 8 hours was started. Five samples of hindmilk were obtained from day 6 to day 9 postpartum over 37 hours. The highest measured level was 644 mcg/L and the lowest was 246 mcg/L. Over the collection period the average breastmilk level was 480 mcg/L. The average infant intake was estimated to be 71 mcg/kg daily, which was 0.13% of the weight-adjusted maternal dosage. The maximum infant intake was estimated to be 97 mcg/kg daily, which was 0.18% of the weight-adjusted maternal dosage.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother received meropenem 1 gram IV every 8 hours for 7 days while exclusively breastfeeding her newborn. When questioned later, she stated that her infant had no oral thrush, watery diarrhea, or diaper dermatitis that required antifungal therapy during the month following her meropenem therapy.[1]

An infant was breastfed (extent not stated) until the 4th month postpartum. At 2 months of age, his mother was given a 2-week course of tobramycin and meropenem (dosage not specified) for a cystic fibrosis exacerbation. The infant displayed no change in stool pattern during the maternal treatment and had normal renal function at 6 months of age.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Sauberan JB, Bradley JS, Blumer J, et al. (2012). Transmission of meropenem in breast milk. Pediatr Infect Dis J.
2 Festini F, Ciuti R, Taccetti G, et al. (2006). Breast-feeding in a woman with cystic fibrosis undergoing antibiotic intravenous treatment. J Matern Fetal Neonatal Med.

## Substance Identification

### Substance Name

Meropenem

### CAS Registry Number

96036-03-2

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Carbapenems